# Sildenafil

CASRN: 139755-83-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that sildenafil and its active metabolite in breastmilk are poorly excreted into breastmilk. Amounts ingested by the infant are far below doses given to treat infants and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Sildenafil is metabolized by CYP3A4 and 2C9 to the active metabolite, desmethylsildenafil, which has about one-half the potency of sildenafil.

Maternal Levels. A breastfeeding woman receiving sildenafil 20 mg for pulmonary hypertension. Breastmilk samples were taken 8 hours after a dose, followed by another dose 11 hours after the first. Then further milk samples were obtained about 3.5 and 6 hours after the second dose. The highest sildenafil and desmethylsildenafil milk levels of 4.49 mcg/L and 1.82 mcg/L, respectively, were in the second sample. Concentrations of sildenafil at the first and last samples were 1.64 and 1.67 mcg/L. Concentrations of desmethylsildenafil at the first and last sampling times were 1.18 and 1.73 mcg/L.[1]

A woman breastfeeding her 21-month-old infant was taking 20 mg of sildenafil 3 times daily and 125 mg of bosentan twice daily to treat pulmonary arterial hypertension. She pumped three milk samples collected at home over 24 hours on days 637 and 651 postpartum. Milk sildenafil concentrations ranged from 1.43 mcg/L at the time of the first morning dose to 5.65 mcg/L at 4 hours after a dose; desmethylsildenafil was not measured. The average steady-state milk concentration of sildenafil was 2.8 mcg/L. The patient’s infant was breastfed 3 times daily. The estimated infant doses via milk on the two days were 0.02 and 0.03 mcg/kg in this partially breastfed infant. A fully breastfed infant might receive a dosage as high as 0.43 mcg/kg daily, which translates into a relative infant dose of 0.06%. This dosage would also be far below the infant therapeutic dosage of 1.5 mg/kg.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 23-year-old woman with congenital heart disease and pulmonary hypertension was treated during pregnancy with sildenafil and bosentan in unspecified dosages. These drugs and warfarin were continued postpartum. Her infant was delivered at 30 weeks by cesarean section and weighed 1.41 kg at birth. She nursed the infant in the neonatal intensive care unit for 11 weeks "with good outcome" according to the authors, but the infant died at 26 weeks from a respiratory syncytial virus infection.[3]

A woman breastfeeding her 21-month-old infant was taking 20 mg of sildenafil 3 times daily and 125 mg of bosentan twice daily to treat pulmonary arterial hypertension. The drugs were begun more than 6 months postpartum. The mother did not report any possible adverse effects, serious health problems or hospitalization of the infant in the period from birth until day 651 postpartum when the infant was partially breastfed.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Treprostinil

### References

1 Wollein U, Schech B, Hardt J, et al. Determination and quantitation of sildenafil and its major metabolite in the breast milk of a lactating woman. J Pharm Biomed Anal 2016;120:100-5.26717019
2 Nauwelaerts N, Ceulemans M, Deferm N, et al. Case report: Bosentan and sildenafil exposure in human milk - a contribution from the ConcePTION Project. Front Pharmacol 2022;13:881084.35784689
3 Molelekwa V, Akhter P, McKenna P, et al. Eisenmenger's syndrome in a 27 week pregnancy--management with bosentan and sildenafil. Ir Med J 2005;98:87-8.15869069

## Substance Identification

### Substance Name

Sildenafil

### CAS Registry Number

139755-83-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Phosphodiesterase 5 Inhibitors

Urologic Agents

Vasodilator Agents